# Fennel

## Drug Levels and Effects

### Summary of Use during Lactation

Fennel (Foeniculum vulgare) seeds contain the volatile oil composed largely of anethole, which is a phytoestrogen, as well as fenchone, estragole, 1,8-cineole (eucalyptol), and other constituents. Anethole is excreted in breastmilk.[1] Fennel is a purported galactogogue that has been used in traditional medicine as well as being included in some proprietary mixtures promoted to increase milk supply.[2-16] Two small studies found an increase in some parameters such as milk volume, fat content and infant weight gain with fennel galactogogue therapy. However, no increase in serum prolactin has been found with fennel use in nursing mothers.[17] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[18,19] Immersing the breast in a warm infusion of fennel seeds and marshmallow root has been suggested as a treatment for breast inflammation,[20] but no scientific data are available that support this use. Fennel is generally well tolerated in adults, and fennel oil is "generally recognized as safe" (GRAS) for use in food by the U.S. Food and Drug Administration. It has been safely and effectively used alone and with other herbs in infants for the treatment of colic,[21-23] so the smaller amounts in breastmilk are likely not to be harmful with usual maternal doses. Some sources recommend limiting the duration of treatment to 2 weeks. Excessive maternal use of an herbal tea containing fennel, anise and other herbs appeared to cause toxicity in 2 breastfed newborns that was consistent with toxicity caused by anethole, which is found in fennel and anise. Fennel can cause allergic reactions after oral or topical use affecting the respiratory system or skin, including photosensitivity. Diarrhea and hepatomegaly occurred in a woman taking fennel, fenugreek, and goat's rue as galactagogues.[24] Elevated liver enzymes occurred in another woman taking Mother's Milk Tea, which contains fennel.[25] Avoid excessive sunlight or ultraviolet light exposure while using this herbal. Mothers should avoid fennel if they or their infants are allergic to carrots, celery, or other plants in the Apiaceae family because of possible cross-allergenicity.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Eighteen lactating women were given 100 mg of trans-anethol in a capsule on 3 test days. Milk samples were collected every 2 hours for 8 hours starting at the time of ingestion. Trans-anethol was detected in milk at all collection times, with the average concentrations of 2 mcg/L at 0 hours, 9.9 mcg/L at 2 hours, 9.2 mcg/L at 4 hours, 7.3 mcg/L at 6 hours and 4.3 mcg/L at 8 hours after the dose. The average peak anethole concentration in milk was 23.2 mcg/L. Only small amounts of anethole glucuronide metabolites were present in the milk samples.[1]

Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[26] Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[27,28]

Five women who were nursing infants between 6 and 55 weeks of age drank 950 mL of fennel-anise-caraway tea (Messmer Ostfriesische Tee Gesellschaft Laurens Spethmann GmbH & Co. KG, Seevetal, Germany). The main odorant components of the tea are the following terpenes: limonene, 1,8-cineole, fenchone, estragole, carvone, trans-anethole, p-anisaldehyde and anisketone. Mothers collected milk samples 30 minutes, 1 and 2 hours after ingesting the tea. Ingestion of the tea did not increase the overall terpene content of the milk, but there was wide variation from mother to mother. Some mothers had high background levels of some terpenes, probably from other foods or personal care products. In addition, a sensory panel found no significant change in the odor profile of the breastmilk samples compared to blank samples.[29]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[30]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L.[31]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two breastfed infants, aged 15 and 20 days, were admitted to the hospital for a reported lack of weight gain in the previous 7 to 10 days, caused by "difficult feeding". The parents reported restlessness and vomiting during the past day. One of the mothers also reported feeling drowsy and weak. On examination, the infants were afebrile but had hypotonia, lethargy, emesis, weak cry, poor sucking and weak responses to painful stimuli. Infant laboratory values, electrocardiograms and blood pressures were normal, and septic work-ups were negative. Both mothers had both been drinking more than 2 liters daily of an herbal tea mixture reportedly containing licorice, fennel, anise, and goat's rue to stimulate lactation. After the mothers discontinued breastfeeding and herbal tea, the infants improved within 24 to 36 hours. Symptoms of the affected mother also resolved rapidly after discontinuing the herbal tea. After 2 days, breastfeeding was reinstituted with no further symptoms in the infants. Both infants were doing well at 6 months of age. The authors attributed the maternal and infant symptoms to anethole, which is found in both fennel and anise; however, the anethole levels were not measured in breastmilk, nor were the teas tested for their content.[32]

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and "looked puzzled", but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[26]

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk Tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk Tea bag contained 560 mg of bitter fennel fruit as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[33]

### Effects on Lactation and Breastmilk

A group of 5 nursing mothers were given no herb for 5 days, 15 mL of a 5% infusion of fennel seeds 3 times daily for 10 days, followed by another 5-day control period from days 15 to 20. Their diet and environment were kept constant during the study period. Milk volume was measured daily and milk fat percentage was measured on days 5, 10, 15 and 20. Milk volume and fat content increased somewhat during the 10-day treatment period and carried over for 3 to 5 days after discontinuation.[34] Because of the lack of randomization, blinding and controls, and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of fennel.

One hundred fifty-eight mothers in Iran of who reported difficulty in breastfeeding were given either a proprietary mixture of herbs (Shirafza Drop) or a chlorophyll solution as a placebo. The herbal mixture contained the purported galactogogues fennel, anise, cumin, black seed, and parsley. Infant ages ranged between 0 and 6 months and they were exclusively breastfed. Weight gain of the infants was measured over time. No difference in infant weight gain was seen between the two groups of infants.[35] Blinding and randomization in this study is unclear.

Sixty-six postpartum mothers (22 in each of 3 groups) with no concurrent illnesses were randomly assigned to receive an herbal tea, placebo, or nothing after delivering healthy, full-term infants. Mothers in the herbal tea group received at least 3 cups daily of 200 mL of Still Tea (Humana-Istanbul, Türkiye; containing hibiscus 2.6 grams, fennel extract 200 mg, fennel oil 20 mg, rooibos 200 mg, verbena [vervain] 200 mg, raspberry leaves 200 mg, fenugreek 100 mg, goat's rue 100 mg, and vitamin C 500 mg per 100 grams, per manufacturer's web site November 2011). A similar-looking apple tea was used as the placebo. All women were followed by the same nurse and pediatrician who were blinded to what treatment the mothers received. Mothers who received Still Tea produced more breastmilk with an electric breast pump on the third day postpartum than mothers in the other groups. The infants in the Still Tea group had a lower maximum weight loss, and they regained their birth weights sooner than those in the placebo or no treatment arms. No long-term outcome data were collected. Because many of the ingredients in Still Tea are purported galactogogues, including fennel, no single ingredient can be considered solely responsible for the tea's effects, although the authors attributed the action to fenugreek.[36]

An herbal tea containing fennel, fenugreek, hibiscus, rooibos, vervain, raspberry, goat's rue, and vitamin C (Humana Still-Tee, Humana GmbH, Herford, Germany) or water was randomly given to nursing mothers in a dosage of 3 cups daily beginning on the day of delivery. Several markers of antioxidant capacity were measured in breastmilk on day 1 and again after 7 to 10 days. No difference was found in the markers between mothers who received the tea and the water.[37]

An uncontrolled, nonrandomized, nonblinded study in Iran enrolled 46 healthy nursing mothers between 18 and 35 years of age. At the start of the study, mothers were all nursing their infants and having no difficulty in doing so. The mothers' serum prolactin was measured in the morning before breakfast at least one hour after the previous nursing bout. Prolactin was measured before and after receiving powdered fennel in a dose of 3 grams daily by mouth for 15 days. The average baseline serum prolactin concentration was 64.6 mcg/L. The serum prolactin concentration after fennel therapy was 95.6 mcg/L. The difference was statistically significant. No measurements of milk production were made.[38]

A double-blind study compared the effects of an herbal tea containing 7.5 grams fennel seed powder plus 3 grams of black tea to 3 grams of black tea alone taken three times a day in mothers exclusively nursing their 0- to 4-month old female infants. After 4 weeks, "breastmilk sufficiency" and infant's growth parameters were compared in the two groups. Infants whose mothers received the fennel had greater increases in the frequency of feedings, number of wet diapers, frequency of defecation, weight gain, and a slightly greater increase in head circumference than infants in the control group. No difference was seen in height gain.[39,40]

In a survey of 188 nursing women from 27 states (52% from Louisiana), 29 had used fennel as a galactogogue. Of those who used it, 59% were not sure that it increased their milk supply and 6 reported (unspecified) side effects.[41]

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as melissa, caraway, anise, fennel, goat's rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse, and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mother used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[42] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

Women who had just given birth were randomized to either a syrup containing fennel 3 grams, honey, frankincense (n = 35) or a syrup containing honey, frankincense taken once a day before breakfast for 15 days (n =34). Blood samples were taken at 8 a.m. when fasting and at least 1 hour after breastfeeding on days 1 and 15 postpartum. Prolactin levels were lower on day 15 than on day 1 in both groups, and after adjusting for the serum prolactin level on day 1, no difference was found between the prolactin levels of the two groups on day 15.[17]

In a survey of nursing mothers in Australia, 157 mothers were taking fennel as a galactogogue. On average, mothers rated fennel as being between “slightly effective” and “moderately effective” on a Likert scale. Four percent of mothers taking fennel reported experiencing adverse reactions, most commonly nausea and stomach cramps.[43]

### References

1 Hausner H, Bredie WL, Mølgaard C, et al. Differential transfer of dietary flavour compounds into human breast milk. Physiol Behav 2008;95:118–24.18571209
2 Hardy ML. Women's health series: Herbs of special interest to women. J Am Pharm Assoc (Wash) 2000;40:234–42.10730024
3 Dennehy C, Tsourounis C, Bui L, et al. The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs 2010;39:684–93.21044150
4 Westfall RE. Galactagogue herbs: A qualitative study and review. Can J Midwifery Res Practice 2003;2:22–7. doi:10.22374/cjmrp.v2i2.184
5 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
6 Jackson PC. Complementary and alternative methods of increasing breast milk supply for lactating mothers of infants in the NICU. Neonatal Netw 2010;29:225–30.20630837
7 Abascal K, Yarnell E. Botanical galactagogues. Altern Complement Ther 2008;14:288–94. doi:10.1089/act.2008.14602
8 Alachkar A, Jaddouh A, Elsheikh MS, et al. Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun 2011;6:79–84.21366051
9 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
10 Debong MW, Loos HM. Diet-induced flavor changes in human milk: Update and perspectives. J Agric Food Chem 2020;68:10275–80.32003562
11 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
12 Sibeko L, Johns T. Global survey of medicinal plants during lactation and postpartum recovery: Evolutionary perspectives and contemporary health implications. J Ethnopharmacol 2021;270:113812.33450288
13 Cabada-Aguirre P, López López AM, Mendoza KCO, et al. Mexican traditional medicines for women's reproductive health. Sci Rep 2023;13:2807.36797354
14 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
15 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
16 Sibeko L, Johns T, Cordeiro LS. Traditional plant use during lactation and postpartum recovery: Infant development and maternal health roles. J Ethnopharmacol 2021:114377.34192598
17 Vafaei F, Valizadeh S, Javadzadeh Y, et al. The effect of fennel syrup on prolactin levels of blood serum in newly delivered mothers: A triple-blind randomized controlled trial. Ann Trop Med Public Health 2018;16 (Sp Iss):S44389.
18 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
19 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
20 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165–7.9456733
21 Weizman Z, Alkrinawi S, Goldfarb D, et al. Efficacy of herbal tea preparation in infantile colic. J Pediatr 1993;122:650–2.8463920
22 Alexandrovich I, Rakovitskaya O, Kolmo E, et al. The effect of fennel (Foeniculum vulgare) seed oil emulsion in infantile colic: A randomized, placebo-controlled study. Altern Ther Health Med 2003;9:58–61.12868253
23 Savino F, Cresi F, Castagno E, et al. A randomized double-blind placebo-controlled trial of a standardized extract of Matricariae recutita, Foeniculum vulgare and Melissa officinalis (ColiMil) in the treatment of breastfed colicky infants. Phytother Res 2005;19:335–40.16041731
24 Şahin B, Kaymaz N, Yıldırım S. Herbal remedies for perceived inadequate milk supply are perhaps not as safe as women think: A brief case report. Women Birth 2016;29:e133.27396295
25 Silverman AL, Kumar A, Borum ML. Re: "Herbal use during breastfeeding" by Anderson (Breastfeed Med 2017;12(9):507-509). Breastfeed Med 2018;13:301.29757695
26 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682–92.22405404
27 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47–71.24957890
28 Kirsch F, Horst K, Rohrig W, et al. Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47–71. doi:10.1007/s11306-012-0466-9
29 Denzer MY, Kirsch F, Buettner A. Are odorant constituents of herbal tea transferred into human milk? J Agric Food Chem 2015;63:104–11.25436940
30 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
31 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
32 Rosti L, Nardini A, Bettinelli ME, et al. Toxic effects of a herbal tea mixture in two newborns. Acta Paediatr 1994;83:683.7919774
33 Wagner CL, Boan AD, Marzolf A, et al. The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact 2019;35:248–60.30005170
34 Nikolov P, Avramov NR. Investigations on the effect of Foeniculum vulgare, Carum carvi, Anisum vulgare, Crataegus oxyacanthus, and Galga officinalis on lactation. Izv Meditsinskite Inst Bulg Akad Naukite Sofia Otd Biol Meditsinski Nauki 1951;1:169–82.14888359
35 Shariati M, Mamoori GA, Khadivzade T. The survey of effect of using "Shirafza Drop" by nursing mothers on weight gain (WG) of 0-6 months exclusively breastfed. Horizon Med Sci 2004;10:24–30. http://imtj.gmu.ac.ir/article-1-255-en.html
36 Turkyılmaz C, Onal E, Hirfanoglu IM, et al. The effect of galactagogue herbal tea on breast milk production and short-term catch-up of birth weight in the first week of life. J Altern Complement Med 2011;17:139–42.21261516
37 Kavurt S, Bas AY, Yucel H, et al. The effect of galactagogue herbal tea on oxidant and anti-oxidant status of human milk. J Matern Fetal Neonatal Med 2013;26:1048–51.23363373
38 Honarvar F, Tadayon M, Afshari P, et al. The effect of foeniculum vulgare on serum prolactin level in lactating women. Iran J Obstet Gynecol Infertil 2013;16:18–24. doi:10.22038/ijogi.2013.1878
39 Ghasemi V, Kheirkhah M, Samani LN, et al. The effect of herbal tea containing fennel seed on breast milk sufficiency signs and growth parameters of Iranian infants. Shiraz E Med J 2014;15:e22262. doi:10.17795/semj22262
40 Ghasemi V, Kheirkhah M, Vahedi M. The effect of herbal tea containing fenugreek seed on the signs of breast milk sufficiency in Iranian girl infants. Iran Red Crescent Med J 2015;17:e21848.26430522
41 Bazzano AN, Cenac L, Brandt AJ, et al. Maternal experiences with and sources of information on galactagogues to support lactation: A cross-sectional study. Int J Womens Health 2017;9:105–13.28280392
42 Özalkaya E, Aslandogdu Z, Ozkoral A, et al. Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38–42.29411721
43 McBride GM, Stevenson R, Zizzo G, et al. Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558

## Substance Identification

### Substance Name

Fennel

### Scientific Name

Foeniculum vulgare

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal